# Rho(D) Immune Globulin

CASRN: 887269-77-4

## Drug Levels and Effects

### Summary of Use during Lactation

Rho(D) immune globulin is an immune globulin rich in IgG antibodies against erythrocyte antigen Rho(D). IgG is a normal component of breastmilk. IgG is a normal component of breastmilk that is likely to be partially destroyed in the infant's gastrointestinal tract and poorly absorbed by the infant during breastfeeding. Rho(D) immune globulin is frequently used in nursing mothers and no adverse effects have been reported in breastfed infants. No special precautions are required during breastfeeding.

### Drug Levels

Maternal Levels. Colostrum (3 days postpartum) and milk (7 days postpartum) samples from 2 mothers who were receiving intravenous immunoglobulin (IVIG) for the treatment of common variable immunodeficiency were studied. One mother was receiving 400 to 500 mg/kg of IVIG monthly and the other received 600 to 700 mg/kg of IVIG monthly. The time of the last dose before sample collection was not reported. Immune globulin G (IgG) concentrations were normal in the first mother's colostrum and milk and higher than normal in the colostrum of the second mother. IgM levels were normal in the colostrum and milk first mother and low in the second.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Palmeira P, Costa-Carvalho BT, Arslanian C, et al. (2009). Transfer of antibodies across the placenta and in breast milk from mothers on intravenous immunoglobulin. Pediatr Allergy Immunol.

## Substance Identification

### Substance Name

Rho(D) Immune Globulin

### CAS Registry Number

887269-77-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Immunoglobulins

Immunoglobulin G